# Appalachian bunchflower

## Drug Levels and Effects

### Summary of Use during Lactation

Appalachian bunchflower (Veratrum parviflorum) found in the Southeastern United States that contains several cardiotoxic alkaloids, such as cyclopamine, jervine, veratramine. It has no known use in lactation. A woman who mistakenly ate Appalachian bunchflower had veratramine and cyclopamine in her milk, although the toxicological significance of their presence in milk for the breastfed infant is unknown.

### Drug Levels

Maternal Levels. A nursing mother developed nausea and vomiting approximately 2 hours after ingestion of approximately one tablespoon of cooked Veratrum parviflorum. She had sinus bradycardia with heart rate of 56, with incomplete right bundle branch block. After discharge from the emergency department, she provided 4 milk samples. The initial sample contained 405 mcg/L of veratramine. About 5 hours later, the milk concentration was 136 mcg/L and about 15.5 hours later on the next morning, the milk sample contained 303 mcg/L of veratramine. In a final milk sample 9 hours later, veratramine was undetectable (<44 mcg/L). The cyclopamine concentration of cyclopamine was above the limit of detection (11 mcg/L), but below but below the limit of quantification (32 mcg/L) in all samples.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A nursing mother ingested one tablespoon of cooked Veratrum parviflorum. She had detectable levels of veratramine and cyclopamine in her milk, but no adverse effects were reported in her infant. The extent of nursing after the ingestion was not reported.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Seale JT, Carpenter JE, Eisenstat MD, et al. (2022). Veratrum parviflorum poisoning: Identification of steroidal alkaloids in patient blood and breast milk. Clin Toxicol (Phila).

## Substance Identification

### Substance Name

Appalachian bunchflower

### Scientific Name

Veratrum parviflorum

### Drug Class

Breast Feeding

Lactation

Milk, Human

False Hellbores